# Ondansetron

CASRN: 99614-02-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ondansetron is frequently used for nausea during and after cesarean section, usually in doses of 4 to 8 mg intravenously.[1-4] Use during and after cesarean section appears to not affect the onset of breastfeeding.[1,5] No adverse infant effects have been reported in this setting or among women who received ondansetron postpartum in a pharmacokinetic study. Use of ondansetron in nursing mothers beyond the immediate postpartum setting has not been studied well, but the drug is labeled for use in infants as young as 1 month of age. A computer model demonstrated that the amounts in milk are much less than this dose. No special precautions are required.

### Drug Levels

Maternal Levels. A pharmacokinetic study was performed using opportunistic sampling of a convenience sample of 78 lactating women receiving intravenous ondansetron for the treatment of post-operative nausea and vomiting in a median dose of ondansetron of 4 mg (range 4 to 8 mg). The 78 women included in the analysis contributed a total of 67 plasma samples and 53 usable milk samples. Using the average milk concentration over 24 hours, the daily infant dose was estimated to be 0.002 mg/kg and the RID was 3.7% of a weight-adjusted single maternal dose of 4 mg. These data were used to build a computer model to simulate ondansetron levels in breastmilk. After optimizing the model, the median peak milk concentration was predicted to be 20.2 mcg/L at 0.5 hours after a 4 mg intravenous dose at 2 days postpartum. The estimated daily infant dosage was 5 mcg/kg, which translated into a relative infant dose of 3.3% of the maternal weight-adjusted dosage and was 1.6% of the standard dosage given to infants.[6]

Infant Levels. A pharmacokinetic study was performed using opportunistic sampling of a convenience sample of 78 lactating women receiving intravenous ondansetron for the treatment of post-operative nausea and vomiting in a median dose of ondansetron of 4 mg (range 4 to 8 mg). Among the 20 infant plasma samples that were collected, 7 were below the limit of quantification. Among the 13 infants with a quantifiable plasma concentration, the median concentration was 0.78 mcg/L (range 0 to 7.2) mcg/L. The highest observed concentration among these 13 infants was approximately 10% of the median peak concentration (76.6 mcg/L) observed in an open-label, single-dose pharmacokinetic study conducted in pediatric surgical patients aged 1 to 24 months who received a single 0.1 mg/kg dose of intravenous ondansetron.[6]

### Effects in Breastfed Infants

In a pharmacokinetic study of 78 women who received ondansetron intravenously postpartum, no adverse effects were reported in their breastfed infants.[6]

### Effects on Lactation and Breastmilk

A randomized, double-blind study compared placebo to intravenous ondansetron 4 mg given after cesarean section as prophylaxis for postoperative nausea and vomiting. There was no difference in the time of the first breastfeeding between the two groups.[3]

In a retrospective study of women undergoing cesarean section deliveries, 3 regimens were compared: dexmedetomidine before anesthesia and during delivery (n = 115), normal saline before anesthesia and during delivery and dexmedetomidine after delivery (n = 109), and normal saline before anesthesia and during delivery (n = 168). All women received ondansetron 4 mg as needed and before removal of sutures. The average total amount of ondansetron consumed in the women ranged from 6 mg to 9 mg in the various groups. The time to first production of milk was similar in all groups (25 to 28 minutes).[5]

### References

1 Uerpairojkit K, Chesoh A, Budcharoentong D. Ondansetron for prophylaxis of spinal morphine induced nausea during early rooming in breastfeeding: A randomized placebo controlled trial. J Med Assoc Thai 2017;100:1283–9. http://www.jmatonline.com
2 Suppa E, Valente A, Catarci S, et al. A study of low-dose S-ketamine infusion as "preventive" pain treatment for cesarean section with spinal anesthesia: Benefits and side effects. Minerva Anestesiol 2012;78:774–81.22374377
3 Jelting Y, Klein C, Harlander T, et al. Preventing nausea and vomiting in women undergoing regional anesthesia for cesarean section: Challenges and solutions. Local Reg Anesth 2017;10:83–90.28860857
4 Griffiths JD, Gyte GM, Paranjothy S, et al. Interventions for preventing nausea and vomiting in women undergoing regional anaesthesia for caesarean section. Cochrane Database Syst Rev 2012;2012:CD007579.22972112
5 Zhao W, Ma L, Wang J, et al. Retrospective comparison of the safety and effectiveness of dexmedetomidine versus standard of care before and during cesarean delivery in a maternity unit in Zhengzhou, China. Med Sci Monit 2020;26:e925709.33097682
6 Job KM, Dallmann A, Parry S, et al. Development of a generic physiologically based pharmacokinetic model for lactation and prediction of maternal and infant exposure to ondansetron via breast milk. Clin Pharmacol Ther 2022;111:1111–20.35076931

## Substance Identification

### Substance Name

Ondansetron

### CAS Registry Number

99614-02-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Gastrointestinal Agents

Serotonin Antagonists

Serotonin 5-HT3 Receptor Antagonists